# Furosemide

CASRN: 54-31-9

## Drug Levels and Effects

### Summary of Use during Lactation

Because little information is available on the use of furosemide during breastfeeding and because intense diuresis from high doses might decrease lactation, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. Low doses of furosemide (20 mg daily) do not suppress lactation.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Anecdotal, short-term observations at one medical center found no adverse infant effects from maternal use of furosemide in the immediate postpartum period.[1]

### Effects on Lactation and Breastmilk

Furosemide 20 mg intramuscularly on the first postpartum day followed by 40 mg orally for 4 days has been used in conjunction with fluid restriction and breast binding to suppress lactation within 3 days postpartum.[2] The added contribution of furosemide to fluid restriction and breast binding, which are effective in suppressing lactation, is not known. No data exist on the effects of loop diuretics on established lactation.

A randomized, controlled trial compared postpartum furosemide (n = 192) to placebo (n = 192) in women who had gestational hypertension and preeclampsia. Patients received either a 4- to 5-day course of 20 mg oral furosemide daily or placebo. The first dose was given 6 to 24 hours postpartum and then every 24 hours thereafter until hospital discharge. No difference was found in patient-reported breastfeeding difficulties between the two groups.[3]

A study of mothers with antepartum hypertension were given either furosemide 20 mg or a placebo daily for 5 days postpartum. Mothers reported whether they were exclusively breastfeeding at 2 and 6 weeks postpartum. No difference was found in the rates of exclusive breastfeeding between the furosemide and placebo groups.[4]

### Alternate Drugs to Consider

Chlorothiazide, Hydrochlorothiazide

### References

1 Font LM. Breast milk and drugs. MCN Am J Matern Child Nurs 1989;14:308-9.
2 Cominos DC, Van Der Walt A, Van Rooyen AJ. Suppression of postpartum lactation with furosemide. S Afr Med J 1976;50:251-2.3858
3 Lopes Perdigao J, Lewey J, Hirshberg A, . Furosemide for accelerated recovery of blood pressure postpartum in women with a hypertensive disorder of pregnancy: A randomized controlled trial. Hypertension 2021;77:1517-24.33550824
4 Emeruwa UN, Azad H, Ona S, . Lasix for the prevention of de novo postpartum hypertension: A randomized placebo-controlled trial (LAPP Trial). Am J Obstet Gynecol 2025;232:e1-125.e21.38823570

## Substance Identification

### Substance Name

Furosemide

### CAS Registry Number

54-31-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Loop Diuretics